# Pregabalin

CASRN: 148553-50-8

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that amounts of pregabalin in breastmilk are low and one infant breastfed for 3 months with no discernable adverse effects. Pharmacokinetic model predicted that a maternal dosage of 150 mg daily would not result in a therapeutic level in an exclusively breastfed infant of any age. If pregabalin is required by the mother, it is not a reason to discontinue breastfeeding, but until more data become available, use caution while nursing a newborn or preterm infant. The manufacturer recommends that breastfeeding is not recommended during treatment with pregabalin because of the potential risk of tumorigenicity based on high-dose animal studies over a prolonged period. Pregabalin has been used to treat persistent nipple pain in a few women at an average starting dosage of 100 mg daily.[1]

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database

Maternal Levels. In one woman, the breastmilk pregabalin level was about equal to the maternal serum concentration.[2]

Ten women who averaged 35.6 weeks postpartum (range 20 to 43 weeks) were given pregabalin 150 mg every 12 hours for 4 doses. Milk samples were obtained before the last dose and 5 times during the 24 hours after the last dose. Three additional collections were made between 24 and 48 hours after the last dose in 5 of the subjects. The average peak breastmilk pregabalin concentration was 4.63 mg/L and the average breastmilk pregabalin concentration was 2.05 mg/L. The average daily infant dosage was 0.31 mg/kg, or about 7% of the maternal weight-adjusted dosage.[3]

Infant Levels. The breastfed infant of a woman who was taking pregabalin (dose not specified) as an anticonvulsant during pregnancy and breastfeeding had a pregabalin serum concentration of 429 mcg/L at 48 hours postpartum, which was about 8% of the mother's serum concentration. Some of the infant's serum concentration could have been derived from transplacental passage, because the pregabalin half-life in this and another newborn averaged 17 hours.[2]

A physiologically based pharmacokinetic model demonstrated that with an oral maternal dosage of 150 mg given twice daily, an exclusively breastfed infant would not attain a therapeutic plasma level of about 1.5 mg/L.[4]

### Effects in Breastfed Infants

A nursing mother with Raynaud’s phenomenon of the nipple was taking nifedipine, which resolved the nipple blanching, but not the lancing pain in the breast that occurred several times daily. Pregabalin 75 mg twice daily was added which almost completely resolved the pain. Her infant was exclusively breastfed for 3 months and experienced no adverse effects.[5]

### Effects on Lactation and Breastmilk

A study randomized pregnant women to either a single dose of pregabalin 150 mg (n = 45), 300 mg (n = 45), or placebo (n = 45) orally 1 hour before induction of anesthesia for an elective cesarean section to reduce postoperative analgesia requirements. Three infants of mothers in the pregabalin 300 mg group had difficulty latching on for breastfeeding for 8 hours after delivery although none were sedated.[6]

### Alternate Drugs to Consider

(Neuropathic Pain) Carbamazepine, Gabapentin; (Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Faraoni L, Delfino E, Notarangelo M, et al. Pregabalin for persistent lactating breast pain: A case series. Breastfeed Med 2023;18:A19-A20. doi:10.1089/bfm.2023.29239.abstracts
2 Öhman I, De Flon P, Tomson T. Pregabalin kinetics in the neonatal period, and during lactation. Epilepsia 2011;52 (Suppl 6):249-50. doi:10.1111/j.1528-1167.2011.03207.x
3 Lockwood P, Pauer L, Scavone J, et al. The pharmacokinetics of pregabalin in breast milk, plasma, and urine of healthy postpartum women. J Hum Lact 2016;32:NP1-NP8.26961752
4 Humerickhouse C, Pressly M, Lin Z, et al. Informing the risk assessment related to lactation and drug exposure: A physiologically based pharmacokinetic lactation model for pregabalin. CPT Pharmacometrics Syst Pharmacol 2024;13:1953-66.39460526
5 Gallego H, Aleshaki J. Raynaud phenomenon of the nipple successfully treated with nifedipine and gabapentin. Cutis 2020;105:E22-E3.32717000
6 El Kenany S, El Tahan M. Effect of preoperative pregabalin on post-caesarean delivery analgesia: A dose-response study. Int J Obstet Anesth 2016;26:24-31.26718698

## Substance Identification

### Substance Name

Pregabalin

### CAS Registry Number

148553-50-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics

Anticonvulsants